# Tradipitant

CASRN: 622370-35-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of tradipitant during breastfeeding. Because tradipitant is more than 96% bound to plasma proteins, the amount in milk is likely to be low. If the mother requires tradipitant, it is not a reason to discontinue breastfeeding. Monitor the infant for sedation.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tradipitant

### CAS Registry Number

622370-35-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Neurokinin-1 Receptor Antagonists